# Sacubitril

CASRN: 149709-62-6

## Drug Levels and Effects

### Summary of Use during Lactation

Sacubitril is available in the United States only in combination with valsartan. Milk levels after the lowest dose of the combination are very low. If sacubitril milk levels of the highest dosage (4 times greater) are proportional to maternal dosage, they would still be quite low. Valsartan was undetectable at this dosage, so the combination product appears unlikely to affect the nursing infant.

### Drug Levels

Maternal Levels. Five mothers taking sacubitril 24 mg and valsartan 26 mg (Entresto) twice daily collected milk samples at 0, 1, 2, 4, 6, 8, 10, and 12 hours after taking a dose at steady state. The peak sacubitril milk concentration of 12.2 mcg/L occurred at 1 hour after the dose. Its average concentration was 0.497 mcg/L. The peak LBQ657 milk concentration of 1.52 mcg/L occurred at 4 hours after the dose. Its average concentration was 9.5 mcg/L. Calculated infant dosages of sacubitril and its metabolite were 0.98 mcg/kg and 1.42 mcg/kg daily, which translate into 0.01% and 0.22%, respectively.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two women taking sacubitril 24 mg and valsartan 26 mg (Entresto) did not observe any symptoms in their breastfed infants. Their extent of breastfeeding was not reported.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Falconi S, Okimi A, Wesley S, et al. The concentration of maternal sacubitril/valsartan transferred into human milk is negligible. Front Public Health 2024;12:1389513 38841677

## Substance Identification

### Substance Name

Sacubitril

### CAS Registry Number

149709-62-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Angiotensin-Converting Enzyme Inhibitors

Antihypertensive Agents

ACE Inhibitors

ACEIs